# Halofantrine

CASRN: 69756-53-2

## Drug Levels and Effects

### Summary of Use during Lactation

Halofantrine is no longer available in the US. Because no information is available on the use of halofantrine during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Chloroquine, Mefloquine

### References

1 Chattopadhyay R, Mahajan B, Kumar S. Assessment of safety of the major antimalarial drugs. Expert Opin Drug Saf 2007;6:505-21.17877439

## Substance Identification

### Substance Name

Halofantrine

### CAS Registry Number

69756-53-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents